# Sodium Polystyrene Sulfonate

CASRN: 9080-79-9

## Drug Levels and Effects

### Summary of Use during Lactation

Because sodium polystyrene sulfonate is not orally absorbed, it is unlikely to reach the breastmilk or adversely affect the breastfed infant after maternal administration. No special precautions are required.

A suspension of sodium polystyrene sulfonate has been added directly to breastmilk to lower the potassium concentration of milk for use in infants with renal impairment. In addition to lowering average potassium content by 65%, the calcium content of breastmilk was reduced by 84%.[1] Infants given either expressed breastmilk, formula or a combination of both had their average serum potassium levels decreased by 24% from 6.3 to 4.8 mEq/L. Serum calcium and creatinine also decreased slightly. The infants had no clinically noticeable side effects.[2] Addition of large amounts of sodium polystyrene sulfonate to artificial formula also lowers the calcium, copper, manganese, phosphorus, sulfur and zinc concentrations; whereas the iron, sodium and sulfur content of formulas are increased.[3] Similar changes might occur with breastmilk.

### Effects in Breastfed Infants

Relevant published information was not found as of the revision date.

### Effects on Lactation and Breastmilk

Relevant published information was not found as of the revision date.

### Alternate Drugs to Consider

Patiromer

### References

1 Bonnet L, Goudable J, Accominotti M, et al. (1997). Nephrologie.
2 Thompson K, Flynn J, Okamura D, et al. (2013). Pretreatment of formula or expressed breast milk with sodium polystyrene sulfonate (Kayexalate(R)) as a treatment for hyperkalemia in infants with acute or chronic renal insufficiency. J Ren Nutr.
3 Taylor JM, Oladitan L, Carlson S, et al. (2015). Renal formulas pretreated with medications alters the nutrient profile. Pediatr Nephrol.

## Substance Identification

### Substance Name

Sodium Polystyrene Sulfonate

### CAS Registry Number

9080-79-9

### Drug Class

Breast Feeding

Lactation

Cation Exchange Resins

Chelating Agents